# Iodine

CASRN: 7553-56-2

## Drug Levels and Effects

### Summary of Use during Lactation

Iodine is an essential trace nutrient for all infants that is a normal component of breastmilk. Infant requirements are estimated to be 15 mcg/kg daily in full-term infants and 30 mcg/kg daily in preterm infants.[1] Breastmilk iodine concentration correlates well with maternal urinary iodine concentration and may be a useful index of iodine sufficiency in infants under 2 years of age, but there is no clear agreement on a value that indicates iodine sufficiency, and may not correlate with infant thyroid function tests.[2-4] A milk iodine value of 100 to 200 mcg/L has been suggested to indicate adequate iodine status in lactating women,[5] although a range as wide as 60 to 465 mcg/L has been proposed.[4] Systematic reviews and studies on iodine nutrition found that iodine in breastmilk is adequate in iodine-sufficient countries, but in countries with iodine fortification of foods, many mothers did not obtain adequate iodine and that additional supplementation was desirable.[6-10] In iodine-deficient areas, supplementation of breastfeeding mothers with iodine appears to be more effective than direct supplementation of the infant in reducing infant iodine deficiency.[11] In the United States, a total iodine intake of 290 mcg daily is recommended during lactation; the WHO recommends a total intake of 250 mcg daily.[9] The American Thyroid Association recommends that breastfeeding women should supplement their diet with a daily oral supplement that contains 150 mcg of iodine.[12] Studies of lactating women in the United States found that the median urinary iodine concentration between 2001 and 2020 was 103.0 mcg/L (95% CI 86.1 to 143.5), indicating that many women fell below the minimum level of 100 mcg/L.[13] Vegan and vegetarian mothers appear to have reduced iodine concentrations in their milk and should use iodine supplements.[14] A survey in the United States between 2011 and 2014 found that only 19% of lactating women used a dietary supplement that contained iodine.[15] One study found improved neurodevelopment in the infants of mothers who received 150 mcg of iodine daily during breastfeeding, but a dose of 300 mcg daily did not further improve the outcome.[16]

The use of excessive amounts of iodine in the mother near term and during breastfeeding (e.g., seaweed soup) can increase breastmilk iodine levels and cause transient hypothyroidism in breastfed infants.[17-20] Follow-up at 3 years of age found no long-term thyroid dysfunction in infants exposed to high iodine levels in breastmilk.[21] Supplementing mothers with Grave disease in appropriate doses potassium iodide usually does not adversely affect their breastfed infants, although a few may develop mild hypothyroidism.[22,23] The absorption of iodine can be marked after application to open wounds or mucous membranes. Exposure of mothers to unnecessary iodine who are or will be breastfeeding should be avoided or minimized to the extent possible by avoiding its use on maternal mucous membranes (e.g., vaginal use, wound therapy), avoiding prolonged contact time, avoiding repeated applications, and applying it to the smallest possible surface areas of the body. It is possible that maternal exposure to iodine near term could interfere with thyroid studies done as a part of newborn screening tests.

When treating lactating people after radiation exposure, one dose of potassium iodine 130 mg is recommended at the lowest threshold exposure of >5 Gy to minimize the risk of blocking thyroid function in the fetus or nursing infant. In cases of severe contamination in lactating people, repeat dosing may be given and nursing neonates should be monitored for signs of illness.[24]

### Drug Levels

Iodine is a normal mineral in breastmilk that is essential for the infant's thyroid. Iodine concentrations are highest in colostrum, declining gradually as lactation progresses. The amounts of iodine in breastmilk vary with maternal iodine intake and possibly with genetic variants in the NaI symporter and its activity may be increased by breastfeeding.[25,26] The WHO recommends that lactating women have urinary iodine levels of 100 mcg/L. Others have suggested a breastmilk iodine reference range between 60 and 450 mcg/kg.[9]

Maternal Levels. Usual dietary intake. A study in Thailand compared mothers supplemented with 200 mcg daily of iodine daily to unsupplemented mothers. Breast milk samples were collected from 57 lactating women, 33 of whom received iodine supplementation during pregnancy. The median breastmilk iodine concentration at 2 months postpartum was significantly higher in the supplemented mothers (109 mcg/L) than in unsupplemented mothers 70 mcg/L).[27]

A study of 97 iodine-sufficient women in Switzerland compared two analytic methods. The ICP-MS standard curve method found a median iodine concentration of 245 mcg/kg in pooled milk samples from 25 women while the ICP-MS 129-I isotope ratio method found a median concentration of 183 mcg/kg in pooled milk samples of 66 women.[28]

A study of 36 breastmilk samples from 18 different states in 2003 to 2004 found a mean iodide breastmilk concentrations of 63.3 mcg/L (range 4.5 to 162 mcg/L).[29] Another study of 108 breastmilk samples from 10 women by the same authors found a mean iodide concentration of 87.9 mcg/L (range 3.1-334 mcg/L), and a median concentration of 55.2 mcg/L.[30] The reason for the differences in iodine values between these two studies and the above studies is not clear.

A study in northern Spain compared the milk iodide level of mothers taking a normal diet, including iodized salt and seafood (n = 14), with mothers on the same diet plus a supplement of 200 mg daily of potassium iodide (n = 46). The median breastmilk iodide levels from supplemented mothers of preterm infants was 0.172 mg/L in the supplemented mothers compared to 0.128 mg/L in the unsupplemented mothers. The median breastmilk iodide levels from supplemented mothers of full-term infants was 0.178 mg/L in the supplemented mothers compared to 0.117 mg/L in the unsupplemented mothers. No statistical difference was found between preterm and full term milk iodide in either the supplemented or unsupplemented group. The authors conclude that in this iodine-sufficient area, unsupplemented mothers excrete sufficient amounts of iodide in breastmilk.[31]

A study in Iran, which is considered iodine deficient, compared iodine breastmilk content between control mothers and those supplemented with cow's milk fortified with 150 mcg of iodine per cup. Both groups used iodized salt. Iodine levels in breastmilk were greater in the supplemented group than in the control group at 10, 14 and 30 days, with the median levels ranging from 210 to 242 mcg/L compared to the control group which had median levels ranging from 142 to 162 mcg/L at the same times.[32]

A study in Ethiopia compared administration of capsules containing 225 mcg of iodine given once daily to the provision of iodized salt containing 35 mcg/gram of iodine to mothers who were breastfeeding. At the end of 6 months no difference was found in median breastmilk iodine concentrations between the two groups. Forty-five percent of women had breastmilk iodine levels above 120 mcg/L, which is the level recommended for adequate infant iodine intake. The authors considered the two methods to be equivalent.[33]

A study in 866 pairs of lactating mothers and exclusively breastfed infants from 3 iodine-sufficient study countries and 117 iodine-deficient lactating women from one country. In the 3 iodine-sufficient sites, the estimated iodine excretion revealed a fractional iodine excretion in breastmilk of 42 to 65%. In the iodine-deficient site, a constant proportion (~33%) of total iodine was excreted into breastmilk.[34]

Thirty-six women in the Netherlands took a supplement containing 150 mcg of iodine daily during pregnancy and for 4 weeks postpartum. Milk samples from 33 of the women analyzed at 4 weeks postpartum contained 1.2 micromoles/L (304 mcg/L; range 0.05 to 3 micromoles/L).[35]

A study in Iran randomized mothers to receive placebo (n = 51), 150 mcg (n = 50) or 300 mcg (n = 43) of iodine daily as potassium iodate for 12 months. Milk iodine levels were measured at 1, 2, 4, 6, and 12 months postpartum. In mothers who received iodine, median breastmilk iodine over the 12-month period was greater than in the placebo group. The iodine concentration was 1.39 times higher in the 300 mcg group than that in the 150 mcg group. Iodine milk levels slowly trended downward and at 12 months postpartum, levels in all groups was about 150 mcg/L.[7]

Fifty-seven women in Iceland had foremilk iodine levels measured at 5.5 months postpartum. The median breastmilk iodine content was 84 mcg/L (IQR: 48 to 114 mcg/L).[36]

A study in China compared lactating women from four cities, two with an average drinking water iodine of 57.5 mcg/L and two with an average of 464.8 mcg/L. Median milk iodine levels in the milk of women was 312 mcg/L from the low iodine cities and 1006 mcg/L from the high iodine cities. Living in the high-iodine area for more than 5 years was a strong predictor of breastmilk iodine sufficiency or excess.[37]

Mothers in Tianjen, China, where iodized salt is consumed, had breastmilk iodine levels measured at 1, 4, 8, 12, 16 and 24 weeks postpartum. At 1 week postpartum, 634 mothers participated, and their mean maternal breastmilk iodine was 365 mcg/L (median 225 mcg/L). By 24 weeks postpartum, 151 mothers participated, and breastmilk iodine levels had steadily decreased to a mean of 80 mcg/L (median 121 mcg/L). The authors judged these values to be adequate for infant nutrition.[38]

A study in New Zealand compared the breastmilk iodine concentrations of women taking an iodine supplement (n = 35) to those who were not (n = 52). Mothers who took an iodine supplement had a median milk iodine level of 84 mcg/L and those who took no supplement had a median milk iodine level of 62 mcg/L.[10]

One hundred thirteen mothers who donated milk at a Spanish milk bank had their milk iodine measured on 4 consecutive days. Mothers were 1.5 to 49.4 months postpartum, 83% had a full-term infant and 56% took iodine supplements ranging from 40 to 200 mcg daily. The median iodine concentration in the samples was 148.5 mcg/L and 70% of the mothers had a milk iodine concentration less than the desired intake for preterm infants of 200 mcg/L.[39]

A study of breastmilk iodine concentrations in 25 exclusively breastfeeding pairs found that milk samples taken in the afternoon or after midnight are most representative of iodine concentrations. The iodine concentration in milk was associated with recent iodine intake and maternal 24-hour urinary iodine excretion was the best predictor of breastmilk iodine concentration.[40]

A small study of vegan, vegetarian and omnivore nursing mothers found that vegan and vegetarian women had lower milk iodine concentrations than omnivores and that maternal supplementation with iodine with prenatal vitamins resulted in higher breastmilk iodine concentrations. The authors concluded that iodine supplementation is important in vegan and vegetarian mothers.[14]

A study of 54 mother-infant pairs in China measured daily iodine intake, based on dietary recall, and maternal urinary and breastmilk iodine concentrations. The median breastmilk iodine concentration was 150.3 mcg/L. The authors concluded that lactating women with adequate iodine intake delivered approximately 31.5% of their daily iodine intake to their infants. They also found a stable 59.1% of iodine was excreted in urine. The resulting value could be used to assess maternal iodine status in lactating women using a spot urinary iodine concentration.[41]

Maternal Levels. Elevated iodine intake. Two women were given potassium iodide orally. One was given 325 mg orally 3 times daily to a total of 3.6 grams and the other was given 650 mg orally 3 times daily to a total of 4.6 grams. Milk samples were obtained after the eighth and eleventh doses in the first woman and 2 hours after the last dose in the second woman. The first woman had milk iodide concentrations of about 33 and 29 mg/L and the second had a concentration of about 38 mg/L.[42] The analytic method used in this old study was insensitive and imprecise by modern standards.

Sixteen lactating women were administered 752 mcg of potassium iodide (572 mcg iodine) in the morning after an overnight fast. They also ingested an additional 36 to 685 mcg of dietary iodine during the study period. Breastmilk samples were obtained at baseline and every hour for 8 hours. Breastmilk iodide increased from an average of 46 mcg/L at baseline to a peak of 354 mcg/L. Peak iodine levels in milk occurred at an median of 6 hours (range 5 to 7 hours) after the dose of iodine.[43]

Twenty-three mothers in Japan were treated with potassium iodide for Graves’ disease. Doses were adjusted to maintain normal thyroid function; the median dose was 50 mg daily (range 10 to 100 mg/day). The median breastmilk iodine level was 15.05 mg/L (range 0.831 to 72 mg/L).[22]

A woman developed an abdominal wall abscess 1 week after having a cesarean section. The abscess was treated with systemic antibiotics, and the wound was packed with 60 sq. cm of iodine tampons, containing about 10.5 mg of iodine. On day 29 postpartum, her milk iodine was 4410 mcg/L (normal range 29 to 490 mcg/L). Her iodine therapy was stopped, and 2 days later milk iodine was about 1400 mcg/L; by day 40 postpartum, it was about 1000 mcg/L. By day 60 postpartum, the milk level was below 100 mcg/L.[44]

The mother of a 31-week preterm infant packed her cesarean section wound with iodine-soaked gauze because of wound dehiscence and infection. Her breastmilk iodine concentration at 3 weeks postpartum was 1911 mcg/L (upper limit of normal 185 mcg/L).[45]

A mother used an iodine antiseptic on her episiotomy wound for 10 to 12 days postpartum. At 15 days postpartum, her milk iodine level was 300 mcg/L (normal 100-200 mcg/L).[46]

The mothers of 31 preterm Korean infants was measured for iodine concentration on week 1, 3 and 6 postpartum. Korean mothers have elevated iodine levels from large amounts of dietary iodine in brown seaweed soup during the first month postpartum. Median breastmilk iodine levels were 2529, 1153 and 822 mcg/L at the 3 times, respectively.[17]

A mother ate large amounts of seaweed soup imported from China for the first 10 days postpartum to increase her breastmilk supply. Breastmilk iodine levels were much higher during the time of seaweed consumption at 878 mcg/L total iodine compared to 188 mcg/L 4 weeks later and 144 mcg/L seven weeks later.[19]

A woman who was 5 months postpartum took potassium iodide 150 mg daily for 14 days to prepare for thyroidectomy. A total of 36 human milk samples were collected, 6 during iodide intake and 28 during the 6 sampling days after intake was stopped. The median concentration during pharmacotherapy was 70,805 mcg/L and declined to 64.3 mcg/L within 2 weeks after pharmacotherapy and thyroidectomy. A median daily infant dosage was 10,620 mcg/kg during pharmacotherapy and 14.7 mcg/kg after pharmacotherapy discontinuation. The authors recommended that nursing could safely resume 3 weeks after high maternal intake of potassium chloride.[47]

Infant Levels. Usual maternal intake. A study of 46 nursing mothers supplemented with 200 mg of potassium iodide daily measured the iodine content of their breastfed infants' urine. Urine iodide concentrations were 0.365 mg/L among preterm infants and 0.376 mg/L among full-term infants.[31]

A study in Thailand compared mothers supplemented with 200 mcg daily of iodine daily during pregnancy to unsupplemented mothers. At 2 months of age, exclusively breast-fed infants whose mothers received iodine supplementation (n = 11) had greater urinary iodine concentrations (381 mcg/L) than those whose mothers were not supplemented (n = 14; 216 mcg/L).[27]

A study in Iran, which is considered iodine deficient, compared iodine breastmilk content between control mothers and those supplemented with cow's milk fortified with 150 mcg of iodine per cup. Both groups used iodized salt. Although iodine levels in infant urine were greater in the supplemented group than in the control group at 10, 14 and 30 days, these differences were not statistically significant and all infants were iodine sufficient.[32]

A study in Ethiopia compared administration of capsules containing 225 mcg of iodine given once daily to the provision of iodized salt containing 35 mcg/gram of iodine to mothers who were breastfeeding. At the end of 6 months, no difference was found in the median urinary iodine concentrations between the two groups of breastfed infants. The authors considered the two methods to be equivalent.[33]

A study of infants between 4 and 6 months of age in Bangkok, Thailand measured urinary iodine levels in exclusively breastfed (n = 19), mixed breastmilk and formula (n = 17) and exclusively formula-fed (n = 35) infants. The median urinary iodine concentrations (UIC) of infants and lactating mothers was 282 and 149 mcg/L, respectively. Breastfed infants had a significantly higher median UIC than formula-fed infants. There was a positive correlation between infant and maternal UIC.[48]

A study in Iran randomized mothers to receive placebo (n = 51), 150 mcg (n = 50) or 300 mcg (n = 43) of iodine daily as potassium iodate for 12 months. Among their breastfed infants, the urinary iodine concentration was >100 mcg/L in all groups at all times with no statistically significant differences between groups.[7]

Thirty-two exclusively breastfed infants and 28 partially breastfed infants in Iceland had urinary iodine concentrations measured at 25 weeks of age. The median urinary iodine concentration was 152 mcg/L (IQR: 79 to 239 mcg/L), with no significant difference between exclusively and partially breastfed infants. The amount of urinary iodine was correlated with the mother’s breastmilk iodine concentration. Estimated infant intake was between 67 and 71 mcg of iodine daily.[36]

A study in China compared lactating women from four cities, two with an average drinking water iodine of 57.5 mcg/L and two with an average of 464.8 mcg/L. Median milk iodine levels in the milk of women was 312 mcg/L from the low iodine cities and 1006 mcg/L from the high iodine cities. The median concentration of urinary iodine of the breastfed infants of the mothers with low iodine levels was 427 mcg/L and 1222 mcg/L in the infants of mothers in the high-iodine group.[37]

Exclusively breastfed infants in Tianjen, China, where iodized salt is consumed, had urinary iodine levels measured at 1, 4, 8, 12, 16 and 24 weeks postpartum. At 1 week postpartum, the mean infant urinary iodine was 281 mcg/L (median 284 mcg/L). Breastmilk iodine levels steadily decreased to a mean of 81 mcg/L (median 213 mcg/L) at 24 weeks postpartum. The authors judged these values to be adequate for infant nutrition.[38]

A study in Aydin, Türkiye of 334 mothers and their healthy neonates found a positive correlation between mothers’ breastmilk iodine concentration and their infants’ urinary iodine concentration. The prevalence of neonatal serum TSH >10 microIU/L, which is suggestive of mild iodine deficiency, was 19%.[49]

A study in New Zealand compared the serum iodine concentrations in the infants of women taking an iodine supplement (n = 35) to those who were not (n = 52). Infants of mothers who took an iodine supplement had a median serum iodine level of 150 mcg/L and infants of those who took no supplement had a median milk iodine level of 86 mcg/L.[10]

An analysis of NHANES data in the United States from 2001 to 2020 found the overall median UIC among lactating women from 2001 to 2020 was 103.0 mcg/L (95% CI 86.1 to 143.5 mcg/L). An age-stratified pattern was observed, with older lactating women had lower median UIC, with values consistently below 100 mcg/L, which is considered the minimum for iodine adequacy.[13]

Infant Levels. Elevated maternal intake. The preterm infants of Korean mothers with high levels of breastmilk iodine had relative high urinary iodine levels that were thought to be related to high maternal intake of iodine.[17]

A woman developed an abdominal wall abscess 1 week after having a cesarean section. The abscess was treated with systemic antibiotics, and the wound was packed with 60 sq. cm of iodine tampons, containing about 10.5 mg of iodine. On day 29 postpartum, her breastfed infant's urine contained 3932 mcg/L of iodine (normal range <185 mcg/L). By day 40 postpartum, the infant's urine iodine level was normal.[44]

The mother of a 31-week preterm infant packed her cesarean section wound with iodine-soaked gauze because of wound dehiscence and infection. The urine iodine level of her 2-week-old breastfed neonate was 684 mcg/L (normal range 42 to 350 mcg/L).[45]

A mother used an iodine antiseptic on her episiotomy wound for 10 to 12 days postpartum. At 15 days of age, her infant had a urinary iodine concentration of 410 mcg/L (normal 100 to 200 mcg/L).[46]

Two mothers originally from Asia (Korea and China) reportedly ate large amounts of soup made from seaweed from their home countries in the postpartum period. The infants of both mothers had elevated urinary iodine levels. The Korean mother continued to eat the soup for several weeks postpartum. Her infant's urinary iodine levels were 391 mcg/L and 690 mcg/L (normal range 100 to 300 mcg/L) at 1 and 2 months postpartum. The Chinese mother ate large quantities of seaweed soup for the first 10 days postpartum to increase her breastmilk supply. Her infant's urinary iodine level at 4 weeks of age was 343 mcg/L or 5055 mcg/gram of creatinine (normal range 100 to 300 mcg/gram).[19]

Twenty-three mothers in Japan were treated with potassium iodide for Graves’ disease. Doses were adjusted to maintain normal thyroid function. Their 26 infants (1 pair each of twins and triplets) were breastfed, some exclusively and some partially. The median urinary iodine concentration in the infants' urine was 15.65 mg/L (range 0.157 to 250 mg/L). The infants' median free thyroxine level was 1.01 ng/dL (range 0.61 to 1.55 ng/dL) and median thyrotropin level was 2.1 microIU/mL (range 0.6 to 12.3 microIU/mL).[22]

### Effects in Breastfed Infants

In Switzerland, a girl born at 29 weeks of gestation with adequate size for gestational age showed negative TSH screening on day 5. Her mother developed an abscess of the abdominal wall 1 week after her cesarian section and the wound was packed with tampons containing about 10.5 mg of iodine. The baby's TSH was elevated to 23 milliunits/L on day 23, and 288 milliunits/L on day 29. Free thyroxine (T4) levels were decreased to 2.8 ng/L and free liothyronine (T3) with 1.52 ng/L, without signs or symptoms of hypothyroidism. Iodine contents of maternal milk and of infant urine were 4.4 mg/L and 3.9 mg/L, respectively. Treatment with levothyroxine was started, breastfeeding was discontinued and disinfection with iodine was stopped. The infant's thyroid function tests normalized after 6 days.[44] The infant's abnormal thyroid function tests were probably caused by maternal iodine use.

The mother of a 31-week, 961 gram preterm infant packed her cesarean section wound with iodine-soaked gauze because of wound dehiscence and infection. She was expressing milk for her hospitalized infant. The infant's thyroid function tests were normal at birth, but at 2 weeks of age, the infant's serum thyroxine was borderline low and TSH levels were elevated. One week later, TSH had increased to 77 milliunits/L and both thyroxine and free thyroxine levels were low. Breastmilk was discontinued and levothyroxine was started. The mother discontinued the iodine packing and 1 week later breastmilk feeding was resumed. At 2 months of age, the infant's thyroid function test were normal while taking levothyroxine.[45]

A study of 31 preterm infants born at 34 weeks gestational age or less was performed in Korea where mothers typically ingest large amounts of seaweed soup during the first month postpartum. Subclinical hypothyroidism was frequently found in the infants with high intake of iodine from breastmilk.[17]

A mother used an iodine antiseptic on her episiotomy wound for 10 to 12 days postpartum. At 15 days of age, her infant had elevated TSH and low free T4 serum levels, an enlarged thyroid gland, and an elevated urinary iodine concentration. The infant's symptoms were probably related to maternal iodine application.[46]

Two mothers originally from Asia (Korea and China) reportedly ate large amounts of soup made from seaweed from their home countries in the postpartum period. Their infants had elevated thyrotropin (TSH) levels when tested at 3 to 4 weeks of age and signs of hypothyroidism. Both were treated with thyroid hormones and regained normal thyroid function.[19]

A 21-day-old breastfed (extent not stated) infant presented with unconjugated hyperbilirubinemia. Neonatal TSH screening was normal, but at 21 days it was 87.3 IU/L (normal 0.27 to 4.2 IU/L). Free T4 was 7.3 pmol/L (normal 12 to 22 pmol/L), and the thyroid was slightly enlarged. The infant's parents were of Korean origin, and the mother had consumed 3 to 4 bowls of brown seaweed (Undaria pinnatifidia) soup daily from birth. The infant's hypothyroidism was probably caused by the high iodine content of the seaweed soup.[18]

Twenty-three mothers in Japan were treated with potassium iodide for Graves’ disease. Doses were adjusted to maintain normal thyroid function; the median dose was 50 mg daily (range 10 to 100 mg/day). Their 26 infants (1 pair each of twins and triplets) were breastfed, some exclusively and some partially. Twenty-five of the 26 infants had normal thyroid function. One 5-month-old infant presented with subclinical hypothyroidism, indicated by a blood thyrotropin level of 12.3 microIU/mL, after 1 month of maternal therapy. Two months after potassium iodide discontinuation, the blood thyrotropin level normalized to 2.3 microIU/mL. In other infants, thyrotropin levels deceased over time without discontinuing maternal iodine or breastfeeding.[22] In a follow-on case series, 210 blood samples were obtained from 100 infants (including these 26 infants) who were partially or fully breastfed by 81 mothers taking potassium iodide for Graves’ disease. Upon measurement of TSH and fT4 were evaluated, 12 infants were found to have subclinical hypothyroidism. In 3 infants, TSH normalized in 2 months after stopping breastfeeding and in 7 others, TSH normalized despite continued breastfeeding and maternal iodine supplementation; 2 were lost to follow-up.[23]

A breastfed Korean infant was found to have an elevated TSH at 15 and 22 days of age and a low free T4 level at 22 days of age. The infant also had markedly elevated urine iodine levels. Her mother had been drinking seaweed soup almost daily during pregnancy and postpartum. The infant was started on levothyroxine, and the mother was told to feed the infant formula and stop breastfeeding temporarily. The mother resumed nursing at 1 month of age and levothyroxine was at a lower dose until 4 months of age. The infant's thyroid function remained normal up to 12 weeks off of levothyroxine. It is probable that the thyroid dysfunction was caused by excess iodine in breastmilk.[50]

A Dutch infant was referred to specialists on day 8 of life for abnormal congenital hypothyroidism screening. Laboratory results showed repeatedly increased TSH concentrations, with fT4 in the normal range. The infant’s mother consumed a bowl of wakame miso soup daily, hijiki or arame seaweed once a week and nori seaweed once a week. In addition, she used Chlorella (algae powder) and ‘sweet iron’ supplements during pregnancy. After discontinuation of seaweed, the infant’s TSH concentration gradually decreased but did not normalize. The fT4 concentrations remained in the normal range. As a result of TSH values being >10 milliunits/L, the mother was strongly recommended to supplement her infant with levothyroxine to prevent long-term complications. However, the mother was reluctant to start supplementation because of normal fT4 concentrations. During 9 months of follow-up, the infant’s neurodevelopment was normal.[51]

A study in Tehran, Iran of mothers who planned to exclusively breastfeed their infants randomized mothers to receive placebo (n = 45), 150 mcg (n = 35) or 300 mcg (n = 45) of iodine daily. At 3 years of age, cognitive scores were higher in children whose mothers received 150 mcg daily compared to children whose mothers received placebo. Supplementation with 150 mcg daily had no effect on language or motor development. The 300 mcg dose had no advantage over the 150 mcg dose.[16]

A woman who was 5 months postpartum took potassium iodide 150 mg daily for 14 days to prepare for thyroidectomy. Breastfeeding was temporarily interrupted during maternal treatment, with partial resumption of breastfeeding 1 week after potassium iodide discontinuation. The infant’s thyroid values were within normal ranges at 3 months after discontinuation of maternal treatment and no adverse events were reported for the infant.[47]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Skin Disinfection) Chlorhexidine, Benzalkonium Chloride

### References

1 Ares S, Quero J, de Escobar GM. Iodine balance, iatrogenic excess, and thyroid dysfunction in premature newborns. Semin Perinatol 2008;32:407–12. 19007678
2 Liu S, Sharp A, Villanueva E, et al. Breast milk iodine concentration (BMIC) as a biomarker of iodine status in lactating women and children &lt;2 years of age: A systematic review. Nutrients 2022;14:1691. 35565659
3 Næss S, Aakre I, Strand TA, et al. Infant iodine status and associations with maternal iodine nutrition, breast-feeding status and thyroid function. Br J Nutr 2023;129:854–63. 35535981
4 Liu S, Sharp A, Luo X, et al. The use of breast milk iodine concentration in the first week of lactation as a biomarker of iodine status in breastfeeding women. Br J Nutr 2024;131:286–95. 37642155
5 Andersson M, Braegger CP. The role of iodine for thyroid function in lactating women and infants. Endocr Rev 2022;43:469–506. 35552681
6 Nazeri P, Kabir A, Dalili H, et al. Breast-milk iodine concentrations and iodine levels of infants according to the iodine status of the country of residence: A systematic review and meta-analysis. Thyroid 2018;28:124–38. 29334343
7 Nazeri P, Tahmasebinejad Z, Mehrabi Y, et al. Lactating mothers and infants residing in an area with an effective salt iodization program have no need for iodine supplements: Results from a double-blind, placebo-controlled, randomized controlled trial. Thyroid 2018;28:1547–58. 30272528
8 Farebrother J, Zimmermann MB, Abdallah F, et al. Effect of excess iodine intake from iodized salt and/or groundwater iodine on thyroid function in nonpregnant and pregnant women, infants, and children: A multicenter study in East Africa. Thyroid 2018;28:1198–210. 30019625
9 Rodriguez-Diaz E, Pearce EN. Iodine status and supplementation before, during, and after pregnancy. Best Pract Res Clin Endocrinol Metab 2020;34:101430. 32792134
10 Jin Y, Coad J, Zhou SJ, et al. Use of iodine supplements by breastfeeding mothers is associated with better maternal and infant iodine status. Biol Trace Elem Res 2021;199:2893–903. 33094447
11 Bouhouch RR, Bouhouch S, Cherkaoui M, et al. Direct iodine supplementation of infants versus supplementation of their breastfeeding mothers: A double-blind, randomised, placebo-controlled trial. Lancet Diabetes Endocrinol 2014;2:197–209. 24622750
12 Korevaar TIM, Leung AM, Alexander EK, et al. American Thyroid Association 2026 Guidelines for Thyroid Disease in Preconception, Pregnancy, and Postpartum. Thyroid 2026;36:481–544. 42219800
13 Cheng L, Li Y, Chen Y, et al. Some subgroups of U.S. childbearing women are still at risk of iodine deficiency in the 21 st century: A cross-sectional analysis of NHANES 2001-2020. BMC Pregnancy Childbirth 2025;26:64. 41398564
14 Pawlak R, Juddb N, Donati GL, et al. Prevalence and predictors of low breast milk iodine concentration in women following vegan, vegetarian, and omnivore diets. Breastfeed Med 2022;18:37–42. 36450113
15 Gupta PM, Gahche JJ, Herrick KA, et al. Use of iodine-containing dietary supplements remains low among women of reproductive age in the United States: NHANES 2011-2014. Nutrients 2018;10:422. 29596306
16 Nazeri P, Tahmasebinejad Z, Pearce EN, et al. Does maternal iodine supplementation during the lactation have a positive impact on neurodevelopment of children? Three-year follow up of a randomized controlled trial. Eur J Nutr 2021;60:4083–91. 33974129
17 Chung HR, Shin CH, Yang SW, et al. Subclinical hypothyroidism in Korean preterm infants associated with high levels of iodine in breast milk. J Clin Endocrinol Metab 2009;94:4444–7. 19808851
18 Hulse T. Transient neonatal hypothyroidism resulting from maternal ingestion of a traditional Korean seaweed soup. Horm Res Paediatr 2012;78 (Suppl 1):127–8. 22832081
19 Emder PJ, Jack MM. Iodine-induced neonatal hypothyroidism secondary to maternal seaweed consumption: A common practice in some Asian cultures to promote breast milk supply. J Paediatr Child Health 2011;47:750–2. 21276114
20 Ju DL, Cho SW, Chung CW, et al. High intakes of iodine among women during pregnancy and the postpartum period has no adverse effect on thyroid function. Eur J Nutr 2022;62:239–49. 35947162
21 Park SJ, Lee DK, Lee HJ. Excessive iodine intake during lactation is not related to the incidence of thyroid disease: A 3-year follow-up study. Nutrients 2025;17:476. 39940338
22 Hamada K, Mizokami T, Maruta T, et al. Effects of inorganic iodine therapy administered to lactating mothers with Graves disease on infant thyroid function. J Endocr Soc 2017;1:1293–300. 29264454
23 Hamada K, Mizokami T, Maruta T, et al. Thyroid function of infants breastfed by mothers with Graves disease treated with inorganic iodine: A study of 100 cases. J Endocr Soc 2020;5:bvaa187. 33381674
24 Riser A, Perez M, Snead MC, et al. CDC Division of Reproductive Health's Emergency Preparedness Resources and Activities for Radiation Emergencies: Public health considerations for women' reproductive health. J Womens Health 2023;32:1271–80.
25 Siro SS, Baumgartner J, Schoonen M, et al. Characterization of genetic variants in the SLC5A5 gene and associations with breast milk iodine concentration in lactating women of African descent: The NUPED Study. Front Nutr 2021;8:692504. 34368208
26 Ramesh S, Basu S. Differential physiological sodium iodide symporter expression in lactating breasts. J Assoc Physicians India 2022;70:11–2.
27 Sukkhojaiwaratkul D, Mahachoklertwattana P, Poomthavorn P, et al. Effects of maternal iodine supplementation during pregnancy and lactation on iodine status and neonatal thyroid-stimulating hormone. J Perinatol 2014;34:594–8. 24743135
28 Dold S, Baumgartner J, Zeder C, et al. Optimization of a new mass spectrometry method for measurement of breast milk iodine concentrations and an assessment of the effect of analytic method and timing of within-feed sample collection on breast milk iodine concentrations. Thyroid 2016;26:287–95. 26563466
29 Kirk AB, Martinelango PK, Tian K, et al. Perchlorate and iodide in dairy and breast milk. Environ Sci Technol 2005;39:2011–7. 15871231
30 Kirk AB, Dyke JV, Martin CF, et al. Temporal patterns in perchlorate, thiocyanate, and iodide excretion in human milk. Environ Health Perspect 2007;115:182–6. 17384762
31 González-Iglesias H, de la Flor St Remy RR, López-Sastre J, et al. Efficiency of iodine supplementation, as potassium iodide, during lactation: A study in neonates and their mothers. Food Chem 2012;133:859–65. doi:10.1016/j.foodchem.2012.01.104
32 Nazeri P, Mirmiran P, Tahmasebinejad Z, et al. The effects of iodine fortified milk on the iodine status of lactating mothers and infants in an area with a successful salt iodization program: A randomized controlled trial. Nutrients 2017;9:180. 28241419
33 Gebreegziabher T, Stoecker BJ. Comparison of two sources of iodine delivery on breast milk iodine and maternal and infant urinary iodine concentrations in southern Ethiopia: A randomized trial. Food Sci Nutr 2017;5:921–8. 28748081
34 Dold S, Zimmermann MB, Aboussad A, et al. Breast milk iodine concentration is a more accurate biomarker of iodine status than urinary iodine concentration in exclusively breastfeeding women. J Nutr 2017;147:528–37. 28228508
35 Stoutjesdijk E, Schaafsma A, Dijck-Brouwer DAJ, et al. Iodine status during pregnancy and lactation: A pilot study in the Netherlands. Neth J Med 2018;76:210–7. 30019676
36 Petersen E, Thorisdottir B, Thorsdottir I, et al. Iodine status of breastfed infants and their mothers' breast milk iodine concentration. Matern Child Nutr 2020;16:e12993. 32162412
37 Liu L, Liu J, Wang D, et al. Effect of urinary iodine concentration in pregnant and lactating women, and in their infants residing in areas with excessive iodine in drinking water in Shanxi Province, China. Biol Trace Elem Res 2020;193:326–33. 30982202
38 Chen Y, Gao M, Bai Y, et al. Variation of iodine concentration in breast milk and urine in exclusively breastfeeding women and their infants during the first 24 wk after childbirth. Nutrition 2020;71:110599. 31901706
39 Ureta-Velasco N, Keller K, Escuder-Vieco D, et al. Assessment of iodine concentration in human milk from donors: Implications for preterm infants. Nutrients 2022;14 36615673
40 Guo W, Wu W, Gao M, et al. Characteristics and predictors of breast milk iodine in exclusively breastfed infants: Results from a repeated-measures study of iodine metabolism. Front Nutr 2022;9:1017744. 36438740
41 Zhang Y, Zhao X, Meng H, et al. Estimation of iodine nutrition status among lactating women with adequate iodine based on fractional iodine excretion in urine. Br J Nutr 2025;134:297–303. 40790513
42 Kwit NT, Hatcher RA. Excretion of drugs in milk. Am J Dis Child 1935;49:900–4.
43 Leung AM, Braverman LE, He X, et al. Breastmilk iodine concentrations following acute dietary iodine intake. Thyroid 2012;22:1176–80. 23050787
44 Casteels K, Punt S, Bramswig J. Transient neonatal hypothyroidism during breastfeeding after post-natal maternal topical iodine treatment. Eur J Pediatr 2000;159:716–7. 11014479
45 Smith VC, Svoren BM, Wolfsdorf JI. Hypothyroidism in a breast-fed preterm infant resulting from maternal topical iodine exposure. J Pediatr 2006;149:566–7. 17011335
46 Kurtoğlu S, Akın L, Akın MA, et al. Iodine overload and severe hypothyroidism in two neonates. J Clin Res Pediatr Endocrinol 2009;1:275–7. 21274309
47 Van Neste M, Krutsch K, Ceulemans M, et al. Iodine concentrations in human milk after maternal high therapeutic potassium iodide dosing during breastfeeding: A contribution from the ConcePTION project. Ther Adv Endocrinol Metab 2026;17:20420188261459822. 42676513
48 Dumrongwongsiri O, Chatvutinun S, Phoonlabdacha P, et al. High urinary iodine concentration among breastfed infants and the factors associated with iodine content in breast milk. Biol Trace Elem Res 2018;186:106–13. 29549532
49 Kart PÖ, Türkmen MK, Anık A, et al. The association of lactating mothers' urinary and breast milk iodine levels with iodine nutrition status and thyroid hormone levels of newborns. Turk Arch Pediatr 2021;56:207–12. 34104910
50 Hamby T, Kunnel N, Dallas JS, et al. Maternal iodine excess: An uncommon cause of acquired neonatal hypothyroidism. J Pediatr Endocrinol Metab 2018;31:1061–4. 30052521
51 Vlaardingerbroek H. Unusual cause of congenital hypothyroidism in a term infant. BMJ Case Rep 2021;14:e237930.

## Substance Identification

### Substance Name

Iodine

### CAS Registry Number

7553-56-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents, Local

Antibacterial Agents